# Carbamazepine

CASRN: 298-46-4

## Drug Levels and Effects

### Summary of Use during Lactation

Breastfeeding during carbamazepine monotherapy does not appear to adversely affect infant growth or development, and breastfed infants had higher IQs and enhanced verbal abilities than nonbreastfed infants at 6 years of age in one study.[1] A safety scoring system finds carbamazepine possible to use during breastfeeding.[2] If carbamazepine is required by the mother, it is not a reason to discontinue breastfeeding.

Carbamazepine and its active metabolite have relatively high levels in breastmilk and breastfed infants have serum levels that are sometimes measurable, but usually well below the anticonvulsant therapeutic range. Most infants have had no adverse reactions, but sedation, poor sucking, withdrawal reactions and 3 cases of hepatic dysfunction have been reported. These have all been complicated because of intrauterine exposure and, in some cases, concurrent drug therapy. Monitor the infant for jaundice, drowsiness, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of anticonvulsant or psychotropic drugs. One author recommends monitoring infant serum carbamazepine levels, liver enzymes, and a complete blood count during therapy.[3]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. Three women taking carbamazepine and phenytoin for epilepsy had carbamazepine and its epoxide metabolite measured in breastmilk. One woman receiving 6 mg/kg daily had carbamazepine milk levels of 1.8, 1.3 and 1.8 mg/L and epoxide metabolite levels of 0.7, 0.5 and 1.1 mg/L on days 2, 3 and 30 postpartum, respectively. A second woman taking carbamazepine 5.8 mg/kg daily had milk carbamazepine levels of 1.5 and 1.8 mg/L and epoxide metabolite levels of 0.7 and 0.9 mg/L at 3 and 5 weeks postpartum, respectively. The third woman taking carbamazepine 7.3 mg/kg daily had a carbamazepine milk level of 1.5 mg/L and epoxide metabolite level of 0.5 mg/L at 3 weeks postpartum.[4,5]

Three carbamazepine breastmilk levels were measured between days 3 and 32 postpartum at unstated times after the dose in an unstated number of women who were taking carbamazepine and other anticonvulsants in unstated dosages. Carbamazepine milk levels averaged 1.9 mg/L (range 0.8 to 3.8 mg/L), while maternal serum levels averaged 4.3 mg/L.[6]

An epileptic woman was taking carbamazepine 1 gram daily and primidone 1 gram daily during pregnancy and postpartum. At 5 weeks postpartum, a milk sample was measured. The milk fat contained 1.4 mg/L while the skimmed portion contained 2.3 mg/L of carbamazepine.[7]

Four mothers taking carbamazepine monotherapy in an average dosage of 10.95 mg/kg daily had average milk levels of 1.78 mg/L at various times during the first month postpartum. Carbamazepine epoxide milk levels measured in 3 of the women averaged 0.39 mg/L.[8]

Sixteen women taking carbamazepine alone or with other anticonvulsants had breastmilk levels measured, 14 during the first week postpartum, 1 at 24 days and 1 at 35 days postpartum. Their average dosage was 13.8 mg/kg daily. Milk carbamazepine levels averaged 2.5 mg/L. Carbamazepine epoxide was measured in the milk of 6 of the women and averaged 1.5 mg/L. In 9 of the women, milk carbamazepine levels were measured on more than 1 occasion; no marked interday differences were found.[9]

Six women taking carbamazepine at an average dosage of 733 mg daily (range 600 to 1000 mg daily) had an average breastmilk carbamazepine level of 2.4 mg/L (range 1.2 to 3.4 mg/L) during the first week postpartum. Milk levels averaged 50% (range 32 to 80%) of maternal serum levels.[10]

One mother taking carbamazepine 200 mg twice daily had breastmilk carbamazepine levels of 2.8 and 2.2 mg/L at 2 and 63 days postpartum.[11]

A woman was taking carbamazepine 300 mg twice daily plus fluoxetine and buspirone for bipolar disorder. Her breastmilk carbamazepine levels were unmeasurable (<0.5 mg/L) on day 13 postpartum and 0.5 mg/L on day 21 postpartum.[12]

Breastmilk levels of carbamazepine and its metabolite were measured in one milk sample taken 8 hours after a dose of 200 mg of carbamazepine. The carbamazepine concentration was 2.3 mg/L and the carbamazepine epoxide concentration was 1.5 mg/L.[13]

Seven women taking an average of 520 mg (range 250 to 800 mg daily) of carbamazepine daily had breastmilk levels measured on 1 or more occasions during the first 34 days postpartum, although all but 2 levels were taken during the first 5 days. The average milk levels of carbamazepine and its epoxide metabolite were 3.5 and 1.3 mg/L, respectively. Milk levels of the drug and metabolite were 64% and 79% of simultaneous maternal levels.[14]

Sixty-one women taking carbamazepine had measurements of carbamazepine taken between day 6 and 29 postpartum (median 7 days) for routine monitoring. Sixty had serum and breastmilk analyzed and one had only milk analyzed; 58 also had carbamazepine epoxide measured. Milk carbamazepine levels ranged from 0.5 to 6.7 mg/L (mean 2.1 mg/L); milk carbamazepine epoxide levels ranged 0.3 to 3.7 mg/L (median 0.5 mg/L). Only 7% of the milk carbamazepine levels were in the therapeutic range used for treating epilepsy. Concomitant valproic acid use by mothers increased carbamazepine epoxide levels in maternal serum and milk.[15]

A nursing mother was taking carbamazepine 600 mg twice daily at 8 am and 8 pm in late pregnancy and postpartum. Breastmilk concentrations were measured on one day at 8 am, 11 am and 2 pm. Milk levels were 3.5, 4.4 and 3.1 mg/L, respectively.[16]

Infant Levels. An infant whose mother was taking carbamazepine 6 mg/kg daily during pregnancy and postpartum had carbamazepine serum levels of 1.1, 1.3 and 1.8 mg/L days 2, 3 and 30 of age, respectively. The epoxide metabolite was only detectable on day 2 at a concentration of 0.3 mg/L. Another infant whose mother was taking carbamazepine 5.8 mg/kg daily during pregnancy and postpartum had a carbamazepine serum level of 0.5 mg/L and undetectable epoxide metabolite level at 5 weeks of age. Infant carbamazepine serum levels in these 2 infants averaged 44% of the simultaneous maternal carbamazepine serum levels.[4,5]

Three breastfed infants had steady-state serum carbamazepine levels measured during maternal therapy. The mother's dosages and corresponding infant serum levels are as follows: 10.3 mg/kg daily and 0.5 mg/L at 5 days of age; 22 mg/kg daily and 1 mg/L at 28 days of age; 10.6 mg/kg and 4.7 mg/L at 28 days of age. The latter mother was also taking ethosuximide and clonazepam. The epoxide metabolite was not measured.[8]

An infant whose mother was taking carbamazepine 200 mg twice daily had serum carbamazepine levels of 1.8 and 1.1 mg/L at 2 days and 63 days of age. The infant was exclusively breastfed for 9 days and partially breastfed thereafter.[11]

Total and free carbamazepine levels of 0.7 and 0.22 mg/L, respectively, were measured in a breastfed 3-month-old whose mother was taking carbamazepine 200 mg in the morning and 300 mg at bedtime (about 8 mg/kg daily). The serum sample was taken about 14 hours after the last dose. Total and free levels were 15% and 20% of the simultaneous maternal serum total and free levels.[17]

An exclusively breastfed newborn infant was receiving milk from a mother receiving carbamazepine 600 mg every 12 hours with breastmilk carbamazepine levels ranging from 3.1 to 4.4 mg/L during a dosage interval. The infant's serum carbamazepine level measured at the time of the mother's morning dose was 1.3 mg/L. The baby had symptoms of gastroesophageal reflux until breastfeeding was discontinued.[16]

In a multicenter study of nursing mother-infant pairs, 11 infants had blood samples taken at about the same time as maternal blood samples. All of the infants had blood levels of carbamazepine below the lower limit of quantification (0.7 mg/L) and only one had a blood level of carbamazepine 10,11-epoxide greater than the lower limit of quantification (0.1 mg/L). The authors estimated the average infant carbamazepine serum concentration to be 0.35 mg/L, assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels of carbamazepine were 5.7% (range 3.7 to 8.4%) and median carbamazepine epoxide infant blood levels were 5.4% (range 0.9 to 9.6%) of their mothers’ blood levels.[18]

Sixty-three infants whose mothers were taking carbamazepine had serum measurements of carbamazepine taken between day 6 and 29 postpartum (median 7 days) for routine monitoring. Forty-nine infants had paired maternal serum levels. Fifty-eight also had carbamazepine epoxide measured. Infant serum carbamazepine levels ranged from 0.5 to 2.6 mg/L (median 0.5 mg/L); carbamazepine epoxide levels ranged 0.3 to 0.6 mg/L (median 0.3 mg/L). No significant correlations were noted between infant serum and maternal serum carbamazepine levels, daily maternal dosage or weight-adjusted dosage. Infant serum levels were below the lower limit of the therapeutic range for epilepsy (4 mg/L), and 65% of infants had values less than the lower limit of quantification (1 mg/L). Ninety-one percent of infant serum carbamazepine epoxide levels were less than the lower limit of quantification (0.5 mg/L).[15]

### Effects in Breastfed Infants

No adverse effects were noted by the mothers in 3 breastfed infants during maternal carbamazepine and phenytoin therapy.[5]

An epileptic woman taking carbamazepine 1 gram and primidone 1 gram daily during pregnancy and postpartum breastfed her infant for 5 weeks and noted no difference in activity in the infant before and after nursing.[7]

A probable case of drug-induced drowsiness occurred in a newborn whose mother was taking primidone, carbamazepine and phenytoin (dosages not stated). At day 30, breastfeeding was discontinued because of the drowsiness that occurred after each feeding and poor weight gain. The same group of researchers found that 15 partially breastfed infants whose mothers were taking various anticonvulsants, including carbamazepine, gained weight at a slower rate during the first 5 days postpartum than did 75 infants of epileptic mothers who bottle fed or control mothers taking no medications.[19]

A 10-week-old breastfed infant whose mother was taking clemastine, phenytoin and carbamazepine was drowsy, refused to feed, was irritable, and had high-pitched crying.[20] These side effects were possibly caused by clemastine in breastmilk, but carbamazepine could also have contributed.

Poor sucking, vomiting and lack of weight gain was reported in a partially breastfed 4-week-old whose mother was taking carbamazepine monotherapy in a dose of 11 mg/kg daily.[8]

Weak sucking occurred in 1 of 15 breastfed infants whose mothers were on carbamazepine monotherapy, but a causal relationship could not be confirmed.[9]

A breastfed infant whose mother was taking primidone 375 mg, phenobarbital 90 mg, and carbamazepine 800 mg daily did well despite a saliva phenobarbital level of 3.4 mg/L. At 7 months of age, after the mother abruptly stop nursing, the infant had a number of "startle reactions" and infantile seizures occurred which were confirmed by an abnormal electroencephalogram. Continued phenobarbital administration to the infant for 15 months controlled the seizures and no more occurred up to 5 years of age.[21]

A 3-week-old infant whose mother was taking carbamazepine monotherapy 600 mg daily during pregnancy and postpartum had persistent jaundice from birth. Cholestasis and elevated hepatic transaminases were found. Jaundice slowly resolved after discontinuation of breastfeeding on day 17 of life, but transaminase values increased to a peak 6.5 weeks after discontinuation of breastfeeding. Cholestatic hepatitis was possibly caused by carbamazepine exposure in utero and in breastmilk.[22]

An infant was born to a mother who was taking carbamazepine monotherapy 400 mg daily during pregnancy and postpartum. The infant was exclusively breastfed for 9 days, then partially breastfed. Jaundice was present at birth and serum gamma-glutamyltransferase (GGT) levels were elevated and remained elevated for at least 25 days, even after bilirubin levels decreased. The infant had a rare form of ABO incompatibility, but this was not thought to fully explain the elevated GGT levels. At 2, 4 and 6 months of age, the infant was developing normally. Serum carbamazepine levels were 1.8 and 1.1 mg/L at 2 days and 63 days of age. The transient hepatic dysfunction was possibly caused by carbamazepine exposure in utero and in breastmilk.[11]

In a telephone follow-up study, mothers reported no side effects among 6 infants exposed to carbamazepine (ages and dosages not stated) in breastmilk.[23]

One author reported a mother who was taking clonazepam 6 mg daily and carbamazepine 1400 mg daily. The infant had serum clonazepam levels of about 40% of the mother's serum level. Her infant was described as "somewhat lazy at the breast and tired." Carbamazepine levels were not reported.[24]

Possible drug-induced seizure-like activity and cyanosis occurred in a breastfed 3-week-old whose mother was taking fluoxetine, carbamazepine and buspirone during pregnancy and postpartum.[12]

A breastfed 3-month-old whose mother was taking carbamazepine 200 mg in the morning and 300 mg at bedtime had normal liver function tests.[17]

A full-term infant whose mother was taking carbamazepine 400 mg daily during pregnancy and postpartum developed asphyxia at birth and required mechanical ventilation. Transient jaundice and liver enzyme elevation were attributed to asphyxia. The mother began breastfeeding on day 8 postpartum. At 3 to 7 weeks of age, cholestasis, jaundice and elevation of hepatic transaminases occurred. The late hepatic abnormalities were considered to be probably caused by carbamazepine in breastmilk.[25]

Two infants were breastfed during maternal therapy with carbamazepine 600 and 1200 mg daily and levetiracetam. The infants appeared to remain healthy throughout the 6- to 8-week study period.[26]

In a long-term study on infants exposed to anticonvulsants during breastfeeding, no difference in average intelligence quotient at 3 years of age was found between infants who were breastfed (n = 26) a median of 6 months and those not breastfed (n = 32) when their mothers were taking carbamazepine.[25] Breastfeeding during carbamazepine monotherapy does not appear to adversely affect infant growth or development, and breastfed infants had slightly higher IQs and enhanced verbal abilities than nonbreastfed infants at 6 years of age in one study.[27] Combination therapy with sedating anticonvulsants or psychotropics may result in infant sedation or withdrawal reactions.

A prospective cohort study in Norway followed infants of mothers who took antiepileptic drugs during pregnancy and lactation and compared them to infants of mothers with untreated epilepsy and infants with fathers who took antiepileptics as control groups. Of the 223 mothers studied, 48 were taking carbamazepine monotherapy. Infants were assessed at 6, 18 and 36 months of age. Continuous breastfeeding in children of women using antiepileptic drugs was associated with no greater impaired development than those with no breastfeeding or breastfeeding for less than 6 months.[28,29]

An exclusively breastfed infant, whose mother took carbamazepine 1200 mg daily during late pregnancy and postpartum, had poor weight gain, poor sucking, and vomiting beginning at birth with normal neurological and laboratory tests. Because gastroesophageal reflux was suspected, ranitidine and food thickeners were tried, but were unsuccessful. High milk and plasma carbamazepine levels were found. Partial formula feeding did not resolve the problem, but cessation of breastfeeding resolved the symptoms rapidly. The adverse effect was probably caused by carbamazepine.[16]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. One woman on long-term carbamazepine therapy had slight galactorrhea 3.5 years after delivery, although her serum prolactin was normal.[9] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

(Seizure Disorder) Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Meador KJ, Baker GA, Browning N, et al. Breastfeeding in children of women taking antiepileptic drugs: Cognitive outcomes at age 6 years. JAMA Pediatr 2014;168:729-36.24934501
2 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
3 Stowe ZN. The use of mood stabilizers during breastfeeding. J Clin Psychiatry 2007;68 (Suppl 9):22-8.17764381
4 Pynnönen S, Sillanpaa M. Carbamazepine and mother's milk. Lancet 1975;306:563.51396
5 Pynnönen S, Kanto J, Sillanpaa M, et al. Carbamazepine: Placental transport, tissue concentrations in foetus and newborn, and level in milk. Acta Pharmacol Toxicol (Copenh) 1977;41:244-53.578653
6 Kaneko S, Sato T, Suzuki K. The levels of anticonvulsants in breast milk. Br J Clin Pharmacol 1979;7:624-7.465285
7 Niebyl JR, Blake DA, Freeman JM, et al. Carbamazepine levels in pregnancy and lactation. Obstet Gynecol 1979;53:139-40.760015
8 Kuhnz W, Jager-Roman E, Rating D, et al. Carbamazepine and carbamazepine 10,11-epoxide during pregnancy and postnatal period in epileptic mothers and their nursed infants and their effects on neonatal behavior. Pediatr Pharmacol (New York) 1983;3:199-208.6677873
9 Froescher W, Eichelbaum M, Niesen M, et al. Carbamazepine levels in breast milk. Ther Drug Monit 1984;6:266-71.6390794
10 Meyer FP, Quednow B, Potrafki A, et al. The perinatal pharmacokinetics of anticonvulsant drugs. Zentralbl Gynakol 1988;110:1195-205.3239295
11 Merlob P, Mor N, Litwin A. Transient hepatic dysfunction in an infant of an epileptic mother treated with carbamazepine during pregnancy and breast feeding. Ann Pharmacother 1992;26:1563-5.1362364
12 Brent NB, Wisner KL. Fluoxetine and carbamazepine concentrations in a nursing mother/infant pair. Clin Pediatr (Phila) 1998;37:41-4.9475699
13 Lopes BR, Barreiro JC, Baraldi PT, et al. Quantification of carbamazepine and its active metabolite by direct injection of human milk serum using liquid chromatography tandem ion trap mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2012;889-890:17-23.22366281
14 Shimoyama R, Ohkubo T, Sugawara K. Monitoring of carbamazepine and carbamazepine 10,11-epoxide in breast milk and plasma by high-performance liquid chromatography. Ann Clin Biochem 2000;37 (Pt 2):210-5.10735366
15 Kacirova I, Grundmann M, Brozmanova H. Therapeutic monitoring of carbamazepine and its active metabolite during the 1st postnatal month: Influence of drug interactions. Biomed Pharmacother 2021;137:111412. doi:10.1016/j.biopha.2021.111412 33761618
16 Antonucci R, Cuzzolin L, Manconi A, et al. Maternal carbamazepine therapy and unusual adverse effects in a breastfed infant. Breastfeed Med 2018;13:155-7.29431474
17 Wisner KL, Perel JM. Serum levels of valproate and carbamazepine in breastfeeding mother-infant pairs. J Clin Psychopharmacol 1998;18:167-9.9555601
18 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441-50.31886825
19 Kaneko S, Suzuki K, Sato T, et al. The problems of antiepileptic medication in the neonatal period: Is breast-feeding advisable? In: Janz D, Bossi L, Dam M, et al., eds. Epilepsy, pregnancy and the child. New York: Raven Press; 1982:343-8.
20 Kok TH, Taitz LS, Bennett MJ, et al. Drowsiness due to clemastine transmitted in breast milk. Lancet 1982;319:914-5.6122135
21 Knott C, Reynolds F, Clayden G. Infantile spasms on weaning from breast milk containing anticonvulsants. Lancet 1987;330:272-3.2886736
22 Frey B, Schubiger G, Musy JP. Transient cholestatic hepatitis in a neonate associated with carbamazepine exposure during pregnancy and breast-feeding. Eur J Pediatr 1990;150:136-8.2279511
23 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9.8498418
24 Schaefer C, Peters P, Miller RK. Drugs during pregnancy and lactation: Treatment options and risk assessment, 3rd ed. Boston: Academic Press; 2015:733. doi:10.1016/C2011-0-09100-7
25 Frey B, Braegger CP, Ghelfi D. Neonatal cholestatic hepatitis from carbamazepine exposure during pregnancy and breast feeding. Ann Pharmacother 2002;36:644-7.11918515
26 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775-7.15857447
27 Meador KJ, Baker GA, Browning N, et al. Effects of breastfeeding in children of women taking antiepileptic drugs. Neurology 2010;75:1954-60.21106960
28 Veiby G, Engelsen BA, Gilhus NE. Early child development and exposure to antiepileptic drugs prenatally and through breastfeeding: A prospective cohort study on children of women with epilepsy. JAMA Neurol 2013;70:1367-74.24061295
29 Vajda F. Epilepsy: Effects of exposure to antiepileptic drugs during development. Nat Rev Neurol 2014;10:11-2.24323050

## Substance Identification

### Substance Name

Carbamazepine

### CAS Registry Number

298-46-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antimanic Agents